# Iodohippurate Sodium I 123

CASRN: 56254-07-0

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of iodohippurate sodium I 123 (I 123 ortho-iodohippurate; I 123 OIH) as a kidney function diagnostic agent. Some older recommendations are to nurse the infant just before administration of the radiopharmaceutical and interrupt breastfeeding for 8 to 12 hours after the dose.[1-3] This recommendation is based on possible contamination with other iodine isotopes, which no longer occurs, so a US Nuclear Regulatory Commission subcommittee has recommended that breastfeeding should be interrupted for only 4 hours after administration of I 123 OIH in doses up to 100 MBq (2.7 mCi) to a nursing mother.[4] Others recommend that no interruption is necessary with doses of 74 MBq (2 mCi).[5] If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[1,6] Mothers need not refrain from close contact with their infants after usual clinical doses.[7]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[8]

### Drug Levels

I 123 is a gamma emitter with a photon energy of 159 keV and a physical half-life of 13.1 hours.[4] The effective half-life of I 123 OIH ranges from 3.5 to 5.8 hours.[1,8]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mountford P, Coakley A. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
2 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44:7-321. doi:10.1177/0146645314558019 26069086
3 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
4 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
5 Stabin M. Doses from medical radiation sources. https://hps.org/hpspublications/articles/dosesfrommedicalradiation.html. Accessed Nov 6, 2024.
6 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020. https://www.gov.uk/government/publications/arsac-notes-for-guidance
7 Mountford P, O'Doherty M. Exposure of critical groups to nuclear medicine patients. Appl Radiat Isot 1999;50:89-111.10028630
8 Stabin M, Breitz H. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203

## Substance Identification

### Substance Name

Iodohippurate Sodium I 123

### CAS Registry Number

56254-07-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes

Diagnostic Agents